# Butabarbital

CASRN: 125-40-6

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is little published experience with butabarbital during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant. Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. A mother who was 4 days postpartum had taken butabarbital 8 mg twice daily for 3.5 days. A milk level of 370 mcg/L was measured 1.5 hours after the previous dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lorazepam, Oxazepam, Zaleplon, Zolpidem

### References

1 Horning MG, Stillwell WG, Nowlin J, et al. (1975). Identification and quantification of drugs and drug metabolites in human breast milk using GC-MS-COM methods. Mod Probl Paediatr.

## Substance Identification

### Substance Name

Butabarbital

### CAS Registry Number

125-40-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Barbiturates

Hypnotics and Sedatives

GABA Modulators